# Pindolol

CASRN: 13523-86-9

## Drug Levels and Effects

### Summary of Use during Lactation

Recommendation for Use During Lactation: Limited information indicates that maternal pindolol produces low levels in milk. It also has a short half-life and only moderate renal excretion, so it would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months.

### Drug Levels

The excretion of beta-adrenergic blocking drugs into breastmilk is largely determined by their protein binding. Those with low binding are more extensively excreted into breastmilk.[1] Accumulation of the drugs in the infant is related to the fraction excreted in urine. With 60% protein binding, 40% renal excretion and a half-life of 3 hours, pindolol presents moderately low risk for accumulation in infants. Pindolol is administered as a racemic mixture, but the (-)-S enantiomer has much more activity than the (+)-R enantiomer.[2]

Maternal Levels. Three women were receiving pindolol 10 mg every 12 hours during pregnancy and postpartum. A single breastmilk sample was collected from each mother on the day of delivery at 11, 12 or 14 hours after the previous pindolol dose. The 2 pindolol enantiomers were measured separately in milk, with (-)-S-pindolol concentration averaging 3.1 mcg/L (range 1.5 to 3.9 mcg/L) and (+)-R-pindolol averaging 1.9 mcg/L (range 1.2 to 4.2 mcg/L).[2] Using the AUC and milk/plasma ratio values reported, a fully breastfed infant would receive an average of 0.36% of the maternal weight-adjusted dosage of pindolol.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information on pindolol was not found as of the revision date. A study of mothers taking beta-blockers during nursing found a numerically, but not statistically significant increased number of adverse reactions in those taking any beta-blocker. Although the ages of infants were matched to control infants, the ages of the affected infants were not stated. None of the mothers were taking pindolol.[3]

### Effects on Lactation and Breastmilk

Relevant published information on the effects of beta-blockade or pindolol during normal lactation was not found as of the revision date. A study in 6 patients with hyperprolactinemia and galactorrhea found no changes in serum prolactin levels following beta-adrenergic blockade with propranolol.[4]

### Alternate Drugs to Consider

Propranolol, Labetalol, Metoprolol

### References

1 Riant P, Urien S, Albengres E, et al. High plasma protein binding as a parameter in the selection of betablockers for lactating women. Biochem Pharmacol 1986;35:4579-81.
2 Goncalves PV, Cavalli RC, Cunha SP, et al. Determination of pindolol enantiomers in amniotic fluid and breast milk by high-performance liquid chromatography: applications to pharmacokinetics in pregnant and lactating women. J Chromatogr B Analyt Technol Biomed Life Sci 2007;852:640-5.
3 Ho TK, Moretti ME, Schaeffer JK, et al. Maternal beta-blocker usage and breast feeding in the neonate. Pediatr Res 1999;45 (4, pt. 2):67A. doi:10.1203/00006450-199904020-00402
4 Board JA, Fierro RJ, Wasserman AJ, et al. Effects of alpha- and beta-adrenergic blocking agents on serum prolactin levels in women with hyperprolactinemia and galactorrhea. Am J Obstet Gynecol 1977;127:285-7.

## Substance Identification

### Substance Name

Pindolol

### CAS Registry Number

13523-86-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Adrenergic Beta-Antagonists

Antiarrhythmics